# Nitazoxanide

CASRN: 55981-09-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that a maternal dose of 500 mg of nitazoxanide produces low levels of an active metabolite, tizoxanide, in breastmilk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. But until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

After oral administration, nitazoxanide is not found in the bloodstream, but is rapidly converted to the active metabolites, tizoxanide and tizoxanide glucuronide, which are detectable in plasma.

Maternal Levels. A volunteer lactating mother took a single 500 mg oral dose of nitazoxanide as a commercial suspension (Nitazode, Al Andalous Medical Co., Cairo, Egypt). The concentration of the active metabolite, tizoxanide, was 1.4 mg/L at 6 hours after the dose. Tizoxanide glucuronide was not measured.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Hadad GM, Abdel Salam, RA, Emara S. Validated and optimized high-performance liquid chromatographic determination of tizoxanide, the main active metabolite of nitazoxanide in human urine, plasma and breast milk. J Chromatogr Sci 2012;50:509-15.22525879

## Substance Identification

### Substance Name

Nitazoxanide

### CAS Registry Number

55981-09-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents